# Patiromer

CASRN: 1260643-52-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because patiromer is not orally absorbed it is unlikely to reach the breastmilk or adversely affect the breastfed infant. No special precautions are required.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Sodium Polystyrene Sulfonate

## Substance Identification

### Substance Name

Patiromer

### CAS Registry Number

1260643-52-4

### Drug Class

- Breast Feeding
- Lactation
- Cation Exchange Resins
- Chelating Agents